# Umeclidinium

CASRN: 869185-19-3

## Drug Levels and Effects

### Summary of Use during Lactation

Although no published data exist on the use of umeclidinium during breastfeeding, it produces low systemic maternal serum levels and any drug in breastmilk would not be absorbed by the infant. The risk to the breastfed infant of maternal umeclidinium inhalation is small. Breastfeeding can be continued during umeclidinium therapy.[1] Combination products such as Anoro Ellipta are acceptable for similar reasons.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Aclidinium, Tiotropium

### References

1 Bendien SA, de Kruif MD, Feitsma H, et al. Summary of the Dutch Multidisciplinary Practice Guideline on Asthma and Pregnancy. J Allergy Clin Immunol Pract 2024;12:1751-62.38513758

## Substance Identification

### Substance Name

Umeclidinium

### CAS Registry Number

869185-19-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Parasympatholytics

Muscarinic Antagonists

Bronchodilator Agents